# Somatropin

CASRN: 12629-01-5

## Drug Levels and Effects

### Summary of Use during Lactation

Limited data indicate that exogenous somatropin does not increase normal breastmilk concentrations of growth hormone and that no adverse effects are experienced by the breastfed infants of mothers who receive somatropin. Growth hormone plasma concentration naturally increase in the first 3 days postpartum, which is thought to help increase milk production. Small studies by one group of investigators found that milk output increases from 19% to 36% after a 7-day course of somatropin. Because mothers were not given extensive breastfeeding support in these studies, the usefulness of the drug as a galactogogue in mothers given adequate breastfeeding support is not known. Galactogogues should never replace evaluation and counseling on modifiable factors that affect milk production.[1,2]

Based on theoretical considerations, the manufacturer of Zomacton 5 mg recommends avoiding the use of the diluent, which contains benzyl alcohol, for lactating women. Instead use preservative-free normal saline as a diluent and discard any remaining drug.

### Drug Levels

Maternal Levels. Eight lactating women were given somatropin 0.1 international units/kg daily subcutaneously for 7 days. There was no difference in human growth hormone concentrations in breastmilk before and 1 day after finishing the course of somatoropin. Milk concentration of insulin-like growth factor-1 (IGF-I) increased by 91% from 1.04 to 1.99 mcg/L over the same time period.[3] In a study of similar design, the same group of investigators reported an increase of 134% in IGF-I over the study period. There was no change in milk concentrations of IGF-II during the study.[4]

Infant Levels. Relevant published information was not found as of the revision date.

### Effects in Breastfed Infants

Among 34 infants in 3 studies who were breastfed during maternal use of subcutaneous somatropin for 7 days during lactation, none were reported to have adverse reactions to the drug. Dosages were 0.05 (n = 5), 0.1 (n = 13) or 0.2 (n = 16) international units daily.[3,5,6]

### Effects on Lactation and Breastmilk

In a double-blind study, normal, lactating women were given somatropin 0.1 international units/kg daily subcutaneously for 7 days or placebo. The 8 women given somatropin increased their average milk output by 157 mL daily from the baseline of 835 mL daily. Placebo-treated patients experienced an increase from 855 mL daily to 955 mL daily. The difference in increase between the two groups was statistically significant. Milk content did not change with therapy.[3]

Ten mothers of premature infants born at an average of 30.6 weeks gestation (range 26 to 34 weeks) were given subcutaneous somatropin to increase their milk supply at an average of 39.7 days postpartum. The dosage was 0.2 international units daily, up to a maximum of 16 international units daily, for 7 days. The amount of milk produced on day 8 was compared to the average amount extracted on the 2 days prior to therapy. Average milk production increased from 139 mL daily to 175 mL daily compared to a statistically nonsignificant increase from 93 mL daily to 102 mL daily in the placebo group. Many of the mothers in the placebo group, but none in the somatropin group, had decreases in production during the study.[6] The differences in baseline milk production between the 2 groups might have affected the response to somatropin and the study did not report the changes, if any, in the proportion of infant nutrition from breastmilk.

The same group studied 16 lactating mothers with normal healthy infants; 5 of the women were having lactational problems. Women received either subcutaneous somatropin 0.05, 0.1 or 0.2 international units daily for 7 days. The two low-dose groups (n = 10) had a 4.7% increase in their milk output; mothers in the high-dose group (n = 6) increased their milk output by 36% from the baseline of 297 mL daily output. Three of the mothers who received the higher dose were able to completely or nearly completely breastfeed their infants.[5]

None of the above studies reported providing mothers with information on breastfeeding technique or any other type of breastfeeding support.

In a study designed to determine the genetic effects of growth hormone administration, 5 nursing mothers were given somatropin (Nortitropin) 0.1 mg/kg by subcutaneous injection once daily at about 8:00 am for 3 days. No difference was found in the average suckling-induced serum prolactin levels on day 1 (baseline) and day 4. Average milk volume did not change over the 4-day study period. The study found that DNA synthesis and cell cycle genes were induced, but no changes were observed in the expression of milk synthesis genes. The authors speculated that the duration of the study might have been too short to observe induction of milk synthesis genes.[7]

A study in 30 pregnant women found that the mean maternal serum growth hormone level progressively increased from an average of 0.2 mIU/L at 36 weeks’ gestation to a peak value of 0.9 mIU/L on postpartum day 3, with levels decreasing to 0.2 mIU/L by postpartum day 4. In vitro studies found that growth hormone increases the metabolism of mammary epithelial cells by increasing mitochondrial activity.[8]

### References

1 Brodribb W. ABM Clinical Protocol #9: Use of galactogogues in initiating or augmenting maternal milk production, second revision 2018. Breastfeed Med 2018;13:307-14.29902083
2 Breastfeeding challenges: ACOG Committee Opinion, Number 820. Obstet Gynecol 2021;137:e42-e53.33481531
3 Milsom SR, Breier BH, Gallaher BW, et al. Growth hormone stimulates galactopoiesis in healthy lactating women. Acta Endocrinol (Copenh) 1992;127:337-43.1449045
4 Breier BH, Milsom SR, Blum WF, et al. Insulin-like growth factors and their binding proteins in plasma and milk after growth hormone-stimulated galactopoiesis in normally lactating women. Acta Endocrinol (Copenh) 1993;129:427-35.7506471
5 Milsom SR, Rabone DL, Gunn AJ, et al. Potential role for growth hormone in human lactation insufficiency. Horm Res 1998;50:147-50.9762002
6 Gunn AJ, Gunn TR, Rabone DL, et al. Growth hormone increases breast milk volumes in mothers of preterm infants. Pediatrics 1996;98 (2 pt 1):279-82.8692630
7 Maningat PD, Sen P, Rijnkels M, et al. Short-term administration of rhGH increases markers of cellular proliferation but not milk protein gene expression in normal lactating women. Physiol Genomics 2011;43:381-91.21205870
8 Elajnaf T, Rostom H, Meng X, et al. Serum growth hormone increases at the onset of lactation and promotes mitochondrial activity in human mammary cells. J Endocr Soc 2023;7:A605. doi:10.1210/jendso/bvad114.1132

## Substance Identification

### Substance Name

Somatropin

### CAS Registry Number

12629-01-5

### Drug Class

Breast Feeding

Lactation

Milk, Human

Galactogogues

Human Growth Hormone